# Tafenoquine

CASRN: 106635-80-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of tafenoquine during breastfeeding. The amounts in milk are acceptable if the infant is not glucose-6-phosphate dehydrogenase (G6PD) deficient, but tafenoquine can cause hemolysis in patients with G6PD deficiency. If tafenoquine is needed by the mother, testing the mother and infant for G6PD deficiency is required before the drug is given. Because the half-life of tafenoquine averages 15 days, the manufacturer recommends that breastfeeding should not breastfeed for 3 months after the dose if the infant is G6PD deficient, which implies complete cessation of nursing.

### Drug Levels

Maternal Levels. Six healthy lactating women with a median weight of 51 kg and infants at least one year old who were planning to stop breastfeeding were given a single dose of 300 mg (6 mg/kg) of tafenoquine. Women had breastmilk samples collected during 5 sampling windows after the dose: 8 to 15 hours, 16 to 24 hours, 30 to 42 hours, 6 to 8 days, and 12 to 16 days. The median peak concentration in breastmilk occurred at a median of 16 hours (range 12 to 36 hours), with a median peak concentration of 308 mcg/L. The authors estimated the median maximum cumulative exposure over the 75 days after a dose to be 0.51 mg/kg, or 8.5% of the maternal dose. Most of the exposure is expected to be in the first week.[1] The authors compared their result to a physiologically based pharmacokinetic model that was previously published that had two very different scenarios depending on how the milk-to-plasma ratio (M/P) was calculated.[2] Results of the clinical study were more consistent with the log-transformed method of M/P calculation.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Primaquine

### References

1 Gilder ME, Wattanakul T, Tarning J, et al. Tafenoquine lactation pharmacokinetics: A pilot study. Malar J 2025;25:15 41345660
2 Almond LM, Abduljalil K, Pansari A, et al. PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50 39930940

## Substance Identification

### Substance Name

Tafenoquine

### CAS Registry Number

106635-80-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents